# Acupuncture

## Drug Levels and Effects

### Summary of Use during Lactation

Acupuncture and acupressure at traditional Chinese medicine (TCM) sites used to treat low milk supply has been claimed to cause release of prolactin and oxytocin, although published studies have found mixed results regarding serum prolactin. Two meta-analyses found that acupressure improved milk production and increased serum prolactin, but the quality and consistency of the studies was variable.[1,2] Massage plus acupressure was the optimal intervention for increasing exclusive breastfeeding rates and shortening time to lactogenesis II. For breast milk volume and serum prolactin levels, acupuncture plus auricular points sticking-pressing showed superior efficacy. Among standalone non-pharmacological therapies, massage and acupressure consistently demonstrated effectiveness across all outcome measures.[2] No serious adverse effects on milk production were seen among lactating women who received acupuncture or acupressure for postpartum sciatica.[1,3]

Acupuncture has been well described in TCM for treating insufficient milk supply,[4,5] and has also been used in some Western countries.[6-8] Numerous studies found acupuncture at CV 17 (also referred to as Ren 17, Danzhong or Shanzong; located at the center of the sternum), SI 1 (Shaoze; on the little finger), ST 18 (Rugen; lower breast margins), Zusanli (ST 36), and Taichong (LR 3) to benefit women with a low postpartum milk supply.[9] These studies generally do not meet current evidence-based guidelines, partly because of the extreme difficulty in double-blinding and placebo-controlling acupuncture studies. However, 2 studies did find a better response to electroacupuncture applied at a traditional site for lactation stimulation (SI 1) than electroacupuncture applied at a site unrelated to milk production (LI 1). Electroacupuncture increased serum prolactin, infant weight and maternal perception of milk production more than domperidone alone.[10] None of the studies reported to date have made an attempt to optimize maternal nursing technique before acupuncture. Although less studied, acupressure at milk acupuncture sites has had similar effects.[11] Systematic reviews concluded that acupuncture and acupressure are effective in increasing serum prolactin and breastmilk volume, although study quality is critically low.[11-15] One preliminary study found that a single acupuncture session improved blood flow to the breasts in women with hypogalactia.[16] Acupressure combined with back massage increases serum prolactin and milk production more than either alone in one study.[17] The combination of acupuncture and Chinese herbal medicines appeared to be more effective in increasing lactation parameters than acupuncture alone.[15]

Acupuncture therapy has been used to treat breastfeeding for milk stasis (engorgement). Randomized, nonblinded studies in an outpatient Swedish lactation clinic compared routine care (including oxytocin spray) to routine care plus acupuncture at 2 or 3 points for treating milk stasis.[18,19] A meta-analysis concluded that women who received acupuncture were less likely to develop an abscess, had less severe symptoms on day five, and had a lower rate of fever than women in the usual care group However, there is insufficient evidence from published trials to justify widespread implementation.[20] A survey of 50 Swedish maternity units in 2007 found that 60% of hospitals used acupuncture to treat milk stasis, 18% used acupuncture to treat mastitis, and 2.2% each used it for painful breastfeeding or to improve milk supply. The authors felt that this extensive use was not justified based on the limited evidence for most of these uses.[21] Acupuncture and acupressure have also been used successfully as a treatment for breast engorgement and pain.[12,22]

Auricular therapy uses stimulation of acupoints on the ear corresponding to various anatomical sites and functions of the body for the diagnosis, treatment, and prevention of disease. All studies applied Vaccaria seeds to press on ear acupoints. Two systematic reviews on auricular therapy to increase milk supply have come to differing conclusions. One review found a positive effect on milk production, onset of lactation, serum prolactin, breast fullness, neonate states, and frequency of newborn urination and defecation.[23] A more recent review found varying efficacy between studies and poor methodology that did not allow for a definitive conclusion on efficacy as a galactogogue.[24] No adverse effects were reported in any studies. A newer additional small study found similar results.[25] A controlled study found that auricular acupressure may slightly increase the pain threshold some areas of the breast in nursing mothers.[26] Single-blind studies found auriculotherapy to increase breastfeeding self-efficacy in the mothers of preterm infants; one showed increased infant weight gain at hospital discharge and the other did not.[27,28]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Galactorrhea has been reported after acupuncture for pain treatment in 2 women who had previously breastfed, but were not currently breastfeeding.[29,30]

In a Polish study, 8 women who had galactorrhea for 2 to 9 years after delivery were given metoclopramide as a diagnostic agent before and after acupuncture. After a 10 mg oral dose of metoclopramide, serum prolactin was measured within the first hour after the dose and at 2 hours after the dose. Women were divided into 2 groups. All women had normal baseline serum prolactin levels, but were hyperresponsive to metoclopramide, with average prolactin elevations of 760% and 926% in the two groups. The women underwent 10 sessions of acupuncture, with each group receiving acupuncture at different points thought to reduce hyperlactation. Although galactorrhea resolved in 1 woman and improved in 3 others, no difference was noted in the prolactin response to metoclopramide stimulation. The authors interpreted this finding to indicate that acupuncture’s effect on galactorrhea is not mediated via prolactin secretion.[31]

An uncontrolled case series on 27 women in Romania who reported insufficient lactation following delivery were given acupuncture, but no instructions on proper breastfeeding techniques. The main acupuncture points were CV 17, SI 1, and ST 18, with some women receiving treatment at additional TCM points. Acupuncture was done daily until milk supply improved, then every 2 to 3 days. No blinding or controls were attempted. Improvement was rated as good in 19 women, satisfactory in 8 women and no response in 4 women. Women who responded required 2 to 7 sessions, while nonresponders received up to 10 sessions. Primiparous women responded with fewer sessions than multiparous women.[32]

An uncontrolled case series from one Chinese hospital reported on 30 women who had insufficient postpartum milk supply and were treated with acupuncture at the CV 17, SI 1, and ST 18 primary sites, with supplementary treatment at ST 36 (Zusanli; middle of shin) and LR 3 (Taichong; dorsal foot near big toe). No instructions on proper breastfeeding techniques were provided. Most reportedly improved to some degree with one treatment and markedly improved with 3 to 5 treatments, especially if treated within 10 days of delivery.[33]

A multicenter, randomized, single-blind clinical trial in China compared breast fullness, amount of milk produced, TCM symptom score, and prolactin levels in two groups of 138 patients. No instructions on proper breastfeeding techniques were reported. One group received electroacupuncture (EA) at the SI 1 site and the control group received EA at the LI 1 site. The percentage of women rated as clinically “cured” or “markedly improved” was 98% in the treatment group and 24% in the control group, which was a statistically significant difference. The TCM score, breast fullness, milk production and prolactin levels were also reportedly better in the group treated at SI 1.[34]

A multicenter, single-blind clinical trial in China compared breast fullness, amount of milk produced, neonatal body weight, artificial feeding frequency and volume, urination frequency and crying time of neonates in 276 women randomized to receive either acupuncture at CV 17 or a traditional herbal galactogogue mixture (Tongre Decoction). No instructions on proper breastfeeding techniques or other support were reported. The endpoints were improved in the two groups, with no significant difference between the two groups.[35]

In a Chinese study, women reporting lactation insufficiency were randomized to receive electroacupuncture bilaterally at the SI 1 site (n = 46) or the LI 1 site (n = 46). Women received a total to 10 treatments. The 24-hour milk volumes and morning serum prolactin levels were measured before and after the treatment course. At the end of therapy, all women receiving acupuncture at the SI 1 site had improved milk volumes compared to 70% at the LI 1 site. Serum prolactin was unchanged from baseline in the treatment group, but was lower at the end of the study in the control group.[36]

A study in Italy randomized women with insufficient milk supply postpartum to receive either acupuncture (n = 41) or routine observation (n = 43). The main acupuncture points were CV 17, SI 1, and ST 18 with some women receiving treatment at additional points, based on TCM diagnoses. Women received a total of 6 treatments over 2 weeks. Before therapy, the rate of exclusive breastfeeding was similar in the 2 groups at about 50%. By 3 weeks after study enrollment, the rate in the observation group was lower (60%) than in the acupuncture group (98%). At 3 months of age, exclusive breastfeeding was 15% in the observation group and 35% in the treated group.[37]

A nonrandomized trial in China used acupuncture at the neiguan and yang chi points to treat engorgement in 40 patients. After treatment, breast tenderness and swelling and milk output were all improved to a statistically significant degree.[38]

A randomized, nonblinded study in Iran compared maternal breastfeeding education to acupressure among women referred for hypogalactia. At 2 and 4 weeks after initiation, both groups had increased milk output, but the volumes of milk were greater in the acupressure group than in the education group.[39]

A study in China of women with cesarean section were randomized into an observation group (n = 28) and a control group (n = 30). The control group received routine care while the observation group acupoints from the breast related meridians received massage for 1 minute starting the 3rd day after operation, and continuously for 5 days. From the 3rd to 5th days, the lactation volume, breast filling and galactostasis (engorgement) score in the observation group were all lower than those in the control group. The difference in milk viscosity was not significant in the first 4 days between the two groups, but on the 5th day, the milk viscosity in the observation group was lower than that in the control group. The investigators concluded that massage at the acupoints from the breast related meridians effectively promotes the lactation secretion in postpartum hypogalactia and alleviates breast distention.[40]

Standard therapy plus tuina therapy, which involves acupoint massage at several acupoints, was compared with standard treatment alone in primiparous mothers with full-term deliveries by cesarean section. Eighty mothers were randomized into the 2 groups of 40 each if they were producing less than 1 mL of milk per feeding at 48 hours postpartum. Mothers in the tunia group received 15 minutes of therapy to each breast daily for 2 days. At 72 hours postpartum, patients who received tunia therapy had greater increases in breast volume, and greater increases in serum prolactin than those who received only standard therapy. Treated women had average increases in milk of about 50 mL between 72 and 96 hours compared to untreated women who had average increases of only about 4 mL during the same time period.[41]

A poorly controlled study compared the milk outputs of two groups of women, those who received acupressure at the CV17, ST18 and SI1 points 3 times a week for 3 weeks (n = 35) and those who did not (n= 35). The control group had no increase in milk output over time, while the mothers receiving acupressure had a steady increase of milk output. At the end of 3 weeks, the average milk production was about 60% higher in the acupressure group.[42]

A study compared postpartum mothers who received postpartum gymnastic exercises (n=40) to those who received acupressure for 5 to 10 minutes daily for 7 days starting at 24 hours postpartum (n=40). Acupressure was applied at the LU 1, CV 17, Si 1 acupuncture points. Milk output was evaluated on days 2, 4 and 7 postpartum. Milk output was slightly (about 17 mL) increased over control on all days in women who received acupressure.[43]

A randomized study of women (n = 20 in each group) who were mixed feeding their infants in the first month postpartum compared 12 sessions of electroacupuncture or low-level laser therapy to the breast over 1 month and control women. All women also received oral domperidone 10 mg three times daily. Both laser therapy and electroacupuncture increased serum prolactin, infant weight and maternal perception of milk production more than domperidone alone. Electroacupuncture increased these values to a greater degree than laser therapy.[10]

A nonblinded, randomized study compared acupressure to no treatment in primiparous mothers who had a cesarean section before 37 weeks of gestation, had an infant in the NICU and were unable to breastfeed. Both groups were given breast pumps and instructed to pump 8 times daily. The acupressure group receive 15 minutes of acupressure at the Tangzhong (CV17), Hegu (L14) and Shaoze (SI1) points. Mothers who received acupressure produced greater quantities of milk at 4 times over the first 2 days postpartum.[44]

A nonrandomized, nonblinded study of women who had undergone cesarean section compared those who received acupoint stimulation, breast massage and Vaccaria seed decoction twice daily for 7 days (n = 74) to those who received routine western medicine nursing intervention (instructing mothers to breastfeed, letting the baby contact and suck early after delivery, dietary guidance and psychological intervention, and instructing mothers to get more exercise). Serum prolactin was greater at 3 days postpartum in the acupoint group than the prenatal prolactin and at 1 day postpartum and in the control group. The acupoint group had a higher exclusive breastfeeding rate, higher milk yield at 48 hours postpartum, and milder breast tenderness than the control group. At 42 days postpartum the acupoint group had a greater infant weight than the control group.[45]

A non-blinded, study randomized postpartum primiparous women who had undergone a cesarean section to either receive or not receive auricular thumbtack needle acupuncture once for 3 days. The lactation initiation time in the treated group was earlier than that in the control group and the breastfeeding score in the treated group was higher than that in the control group. The lactation adequacy rate at postpartum 72 hours postpartum was 63.8% in the treatment and 41.7% in the control group. The exclusive breastfeeding rate at 42 days postpartum was 72.3% in the treated group and 47.9% in the control group. The mRNA and protein expression levels of TDP-43 and Btn1A1 in breastmilk in the observation group were higher than those in the control group. All of these differences were statistically significant. There was no statistically significant differences in mRNA and protein expression of XDH in breastmilk between the two groups.[46]

A nonrandomized convenience sample of mothers of infants in the NICU who would be breast pump-dependent for a prolonged time were compared to a historical sample of mothers. The intervention mothers received acupuncture at the Shao Ze (SI 1), Zusanli (ST 36), Dan Zhong or Shan Zhong (R 17), and Taichong (L 3) points for a maximum of 3 times weekly for the first 30 days postpartum. Milk volumes of the two groups were compared on days 10, 14, 21, and 30 after starting acupuncture and at every time point, pumped milk volume was greater in the group that received acupuncture. Mothers who received corticosteroid therapy prepartum had lower milk volumes in both groups.[8]

A meta-analysis of 19 randomized, controlled trials of acupuncture to increase serum prolactin containing 2400 participants was conducted using 10 databases, including 4 Chinese databases. Secondary outcomes included milk secretion volume (MSV), total effective rate (TER), mammary fullness degree (MFD), and exclusive breastfeeding rate (EBR). Using the GRADE tool, all outcomes were rated as critically low primarily because of low methodological quality, inconsistencies, and publication bias. The quality of evidence was critically low.[15]

A randomized study compared routine care to a regimen of localized breast thermotherapy (warm wet towels), initiated within 2 hours postdelivery and repeated daily for three consecutive days in addition to a six-step acupoint massage technique administered by nurses certified in traditional Chinese medicine lactation support. Several short-term measures of milk production were slightly better in the intervention group.[47] Because of the two interventions (heat and acupressure), it is not possible to separate the effects of acupressure.

A study was carried out to compare acupressure, proper positioning and breast massage to a control group. Back acupressure was done once a week for 15 to 20 minutes for one month. Pressure is applied to the back area by pressing and vibrating using the fingertips at certain points in the T1-T6 back area. Correct positioning was also emphasized. Breast massage was taught to the mother, and she carried it out at home twice weekly for one month. The control group received none of these interventions. Breastmilk production was measured using a manual breast pump performed before mothers breastfed their babies. Subsequently, it was measured using a measuring cup. Milk production was increased to a greater extent in the treatment group than in the control group.[48]

Fifty-four women with a preterm birth were given either acupressure or Milk Booster, containing a hydroalcoholic extract of 50% fennel extract, 20% cumin, 20% fenugreek, and 10% black seed extract [erroneously reported to be fennel in the paper] 30 drops three times and placebo point pressure for 2 weeks. Women given Milk Booster were given sham acupressure. Milk output was measured on the 14^th^ day postpartum once in the morning with a breast pump emptying the breast. Women who received acupressure had more milk (38 mL) than the women receiving Milk Booster (32 mL), which was statistically significant.[49]

A single-blind study compared women with insufficient milk supply on day one after cesarean section who were randomized to either auricular acupressure with a Vaccaria seed or sham therapy. Participants in the acupressure group were trained to perform ear acupressure with Vaccaria seeds eight times daily for the next five days. Of the 68 women who completed the study, participants of the ear acupressure group had a significantly higher score for breastfeeding sufficiency and uterine recovery, assessed by palpability of the uterine fundus on day 5. No differences were found between the groups in breast volume, serum prolactin, or neonatal weight after 5 days.[28]

A randomized controlled study evaluated the efficacy of an herbal galactagogic decoction combined with auricular acupressure in improving lactation outcomes. The decoction was self-formulated consisting of Wangbuliuxing (Vaccaria seeds) 10 grams, Glycyrrhiza glabra (licorice) 6 grams, Astragalus membranaceus 12 grams, Angelica sinensis (dong quai) 12 grams, Atractylodes macrocephala 10 grams, Tongzhi 30 grams, Codonopsis pilosula (dangshen) 12 grams, and Andrographis paniculata (green chiretta) 6 grams. One daily dose was decocted in water to yield approximately 200 mL of liquid, which was divided into 2 oral doses per day. Both groups were treated for 2 weeks. A total of 104 women with postpartum hypogalactia were randomly assigned to a control group (auricular acupressure alone, n = 52) or an intervention group (auricular acupressure plus herbal decoction, n = 52) for 2 weeks. Primary outcomes included milk production and formula supplementation, while secondary outcomes were serum hormone levels (estradiol, progesterone, and prolactin), symptom scores, psychological status, and clinical effectiveness. Compared with the control group, the intervention group demonstrated lower estradiol and progesterone levels, higher prolactin levels, increased milk production, and reduced formula supplementation.[50]

A secondary analysis of a randomized controlled trial of acupuncture for pain control in patients undergoing elective cesarean delivery assessed the potential influence of acupuncture on the need for additional formula feeding. Patients were either given acupuncture (n = 60), placebo acupuncture (n = 60) or standard care alone (n = 60). The median duration of additional formula consumption in newborns of mothers who received acupuncture was shorter than that of mothers in the placebo group: 3 days compared to 4.5 days, and of mothers in the standard care group with 5 days.[51]

A study randomized mothers who had a cesarean delivery to either standard care, including skin-to-skin within 30 to 40 minutes postpartum and breastfeeding guidance to mothers who had standard care plus press needle acupoint stimulation and breast massage. Intermittent pressure on the needles was applied every 3 to 4 h for 20 min per session during the following 24 hours, and the press needles were removed after 24 hours. Mothers in the experimental group also received breast massage combined with low-frequency electronic stimulation was performed 3 times daily for 3 consecutive days by an experienced obstetric nurse. The experimental group showed earlier lactogenesis II onset, higher breastfeeding frequency at 24 to 48 hours and 48 to 72 hours, and higher exclusive breastfeeding rates at 72 hours postpartum. Infants in the experimental group also had less weight loss at 72 hours. Mothers in the experimental group used less formula at 72 hours postpartum and breastmilk from the experimental group contained higher levels of protein, fat, and minerals as well as a slightly higher water content. Maternal serum prolactin and oxytocin levels were also higher in the experimental group.[52]

### References

1 Chang YC, Wang YA, Chang ZY, . Acupoint stimulation for postpartum breastfeeding insufficiency: A systematic review and meta-analysis. Syst Rev 2025;14:32.39901246
2 Chu L, Liu Y, Xu C. Effectiveness of non-pharmacological traditional Chinese medicine therapies in promoting human milk feeding outcomes: a systematic review and network meta-analysis. Int Breastfeed J 2026;21:43.41840680
3 He BS, Li Y, Gui T. Preliminary clinical evaluation of acupuncture therapy in patients with postpartum sciatica. J Midwifery Womens Health 2018;63:214-20.29569351
4 Yao CX. Acupuncture treatment for agalactia. J Tradit Chin Med 1988;8:128.3412011
5 Clavey S. The use of acupuncture in the treatment of insufficient milk supply. Am J Acupunct 1996;24:35-46.
6 Winterfeld U, Meyer Y, Panchaud A, . Management of deficient lactation in Switzerland and Canada: A survey of midwives’ current practices. Breastfeed Med 2012;7:317-8.22224508
7 Pierdant G, Westphal K, Lange A, . Stimulation of lactation using acupuncture: A case study. J Hum Lact 2022;38:559-63.35189736
8 Baker-Fox C, Hayakawa J, McCarty R, . East meets west: Effect of acupuncture on lactation and maternal quality of life. Breastfeed Med 2024;19:291-300.38535968
9 Fan ZL, Yang MF, Yin RP, . Exploration on the acupoint selection rule for the treatment of postpartum hypogalactia with acupuncture and moxibustion based on the set visualization analysis system. Zhongguo Zhen Jiu 2020;40:1138-42.33068361
10 Maged AM, Hassanin ME, Kamal WM, . Effect of low-level laser therapy versus electroacupuncture on postnatal scanty milk secretion: A randomized controlled trial. Am J Perinatol 2020;37:1243-9.31327162
11 Bautista-Hernández MA, Argueta-Figueroa L, Gómez-Jiménez DC, . Evidence of the acupuncture points stimulation for the treatment of hypogalactia: A systematic review and meta-analysis. Enferm Clin (Engl Ed) 2024;34:61-73.38185370
12 Hajian H, Soltani M, Mohammadkhani MS, . The effect of acupressure, acupuncture and massage techniques on the symptoms of breast engorgement and increased breast milk volume in lactating mothers: A systematic review. International Journal of Pediatrics (Mashhad) 2021;9:12939-50. doi:10.22038/ijp.2020.54458.4305
13 Rosetti MA, Spatz DL. Effects of acupressure on lactation: An integrated review. MCN Am J Matern Child Nurs 2022;47:345-52.36227074
14 Fang YW, Chen SF, Wang ML, . Effects of traditional Chinese medicine-assisted intervention on improving postpartum lactation: A systematic review and meta-analysis. Heliyon 2024;10:e27154.38524574
15 Bao QN, Yin ZH, Zhou YF, . Efficacy and safety of acupuncture for postpartum hypogalactia: A systematic review and meta-analysis of randomized controlled trials. PLoS One 2024;19:e0303948.38843204
16 Liu HM, Li XJ, Zhang ZJ, . The effect of a single acupuncture on postpartum hypogalactia. Acupunct Electrother Res 2026doi:10.1177/03601293261440006
17 Rahayu S, Hadisaputro S, Hidayat ST, . Effect of the combination of Roxy back massage (RBM) and lactapressure interventions on prolactin levels and breast milk production: A randomized controlled trial. NeuroQuantology 2022;20:2318-33. doi:10.48047/NQ.2022.20.20.NQ109233
18 Kvist LJ, Wilde Larsson B, Hall-Lord ML, . Effects of acupuncture and care interventions on the outcome of inflammatory symptoms of the breast in lactating women. Int Nurs Rev 2004;51:56-64.14764015
19 Kvist LJ, Hall-Lord ML, Rydhstroem H, . A randomised-controlled trial in Sweden of acupuncture and care interventions for the relief of inflammatory symptoms of the breast during lactation. Midwifery 2007;23:184-95.17052823
20 Mangesi L, Zakarija-Grkovic I. Treatments for breast engorgement during lactation. Cochrane Database Syst Rev 2016;6:CD006946.
21 Mårtensson L, Kvist LJ, Hermansson E. A national survey of how acupuncture is currently used in midwifery care at Swedish maternity units. Midwifery 2011;27:87-92.20092915
22 Farshidfar B, Jafarpour H, Kordasiabi AHS, . The effect of massage and acupressure on breast engorgement: A review. International Journal of Pediatrics (Mashhad) 2020;8:11227-32. doi:10.22038/ijp.2020.47417.3847
23 Chen ML, Tan JY, Suen LK. Auricular therapy for lactation: A systematic review. Complement Ther Clin Pract 2017;29:169-84.29122257
24 Lee B, Kwon CY, Lee SH. Effectiveness and safety of auriculotherapy for breastfeeding: A systematic review. J Tradit Chin Med 2020;40:721-37.33000573
25 Alissa R, Lim M, Hutsell D. The use of auricular acupuncture in promoting breastmilk production in lactating mothers of infants in the neonatal intensive care unit. Breastfeed Med 2022;17:A5-A6. doi:10.1089/bfm.2022.29217.abstracts
26 Han S, Kim B, Park H. Auricular acupressure on breast pain among breastfeeding mothers receiving gentle hand techniques: A randomized, single-blind, sham-controlled trial. J Hum Lact 2024;40:248-58.38379313
27 Rabiee N, Ghasempour Z, Abolhassani M, . Comparing the effect of premature infant care training and performing auriculotherapy techniques on anxiety, general self-efficacy and breastfeeding self-efficacy of mothers with premature infants. Iran J Nurs Midwifery Res 2023;28:772-8.38205410
28 Khorasanian F, Simbar M, Mehrabani M, . The effects of ear acupressure with vaccaria seeds on the breastfeeding-related factors after cesarean section: A randomized, single-blind clinical trial. Current Traditional Medicine 2026;12:e22150838379514. doi:10.2174/0122150838379514250801095517
29 Jenner C, Filshie J. Galactorrhoea following acupuncture. Acupunct Med 2002;20:107-8.12216598
30 Campbell A, Macglashan J. Acupuncture-induced galactorrhoea--a case report. Acupunct Med 2005;23:146.16259314
31 Komorowski JM, Reterski Z, Owczarczyk I. Acupuncture therapy does not change metoclopramide-induced prolactin secretion in normoprolactinaemic galactorrhea syndrome. Endokrynol Pol 1984;35:231-4.6542492
32 Tureanu L, Tureanu V. A clinical evaluation of the effectiveness of acupuncture for insufficient lactation. Am J Acupunct 1994;22:23-7.
33 Zhao Y, Guo H. The therapeutic effects of acupuncture in 30 cases of postpartum hypogalactia. J Tradit Chin Med 2006;26:29-30.16705850
34 Wang HC, An JM, Han Y, . Multicentral randomized controlled studies on acupuncture at Shaoze (SI 1) for treatment of postpartum hypolactation. Zhongguo Zhen Jiu 2007;27:85-8.17370485
35 He JQ, Chen BY, Huang T, . Randomized controlled multi-central study on acupuncture at Tanzhong (CV 17) for treatment of postpartum hypolactation. Zhongguo Zhen Jiu 2008;28:317-20.18652318
36 Wei L, Wang H, Han Y, . Clinical observation on the effects of electroacupuncture at Shaoze (SI 1) in 46 cases of postpartum insufficient lactation. J Tradit Chin Med 2008;28:168-72.19004195
37 Neri I, Allais G, Vaccaro V, . Acupuncture treatment as breastfeeding support: Preliminary data. J Altern Complement Med 2011;17:133-7.21303190
38 Tian HY, Wei LY, Wu CZ. Penetration needling at special points for 40 cases of stopping lactation. Zhongguo Zhen Jiu 2014;34:1035-6.25543446
39 Esfahani MS, Berenji-Sooghe S, Valiani M, . Effect of acupressure on milk volume of breastfeeding mothers referring to selected health care centers in Tehran. Iran J Nurs Midwifery Res 2015;20:7-11.25709684
40 Zhu Y, Liu Y, Quan X. Application of acupoint massage in postpartum hypogalactia in puerpera. Zhongguo Zhen Jiu 2018;38:33-7.29354934
41 Lu P, Ye ZQ, Qiu J, . Acupoint-tuina therapy promotes lactation in postpartum women with insufficient milk production who underwent caesarean sections. Medicine (Baltimore) 2019;98:e16456.31464890
42 Sulymbona N, As’ad S, Khuzaimah A, . The effect of acupressure therapy on the improvement of breast milk production in postpartum mothers. Enferm Clin 2020;30 (Suppl 2):615-8. doi:10.1016/j.enfcli.2019.12.002
43 Erfina, Ahmad M, Usman AN, . Potential of acupressure to be complementary care by midwives in postpartum women’s breast milk production. Enferm Clin 2020;30 (Suppl 2):589-92. doi:10.1016/j.enfcli.2019.12.001
44 Sarı E, Güngör Satılmış İ. The effect of acupressure on lactation in non-breastfeeding mothers after preterm cesarean delivery. Health Care Women Int 2023;44:361-73.36219142
45 Zhan J, Huang N, Meng N, . Lactation prescription plus acupoint stimulation improves breastfeeding quality and alleviates breast tenderness in parturients undergoing cesarean section. Am J Transl Res 2023;15:539-47.36777860
46 Lin QP, Xu JB, Yang J, . Effects of auricular thumbtack needle on lactation function and TDP-43/Btn1A1/XDH pathway in primiparous women with cesarean section. Zhongguo Zhen Jiu 2023;43:771-5.37429656
47 Xie SJ, Zhang Y, Chen Y, . Effect of manual acupoint massage on promoting postpartum milk secretion in cesarean section mothers: Randomized clinical trial. Breast Care 2026;21:18-27. doi:10.1159/000547160
48 Pujiastuti N, Winarni S. Back acupressure, baby positioning and latching, and breast massage increase breast milk production: A controlled clinical trial. Acta Med Philipp 2025;59:93-9.41333567
49 Pouresmaeili N, Shoorab NJ, Sezavar M, . Comparison of the effect of milk booster drops and acupressure on the milk volume of mothers with premature infants: A randomized clinical trial. Iran J Nurs Midwifery Res 2026;31:46-52.41573290
50 Li K, Cai D, Gao Z, . Effect of a herbal galactagogic formula combined with auricular acupressure on breast milk production and hormonal profiles in women with postpartum hypogalactia: A randomized controlled study. Afr J Reprod Health 2026;30:46-54.
51 Usichenko TI, Aselmeyer J, Feig MA, . Acupuncture may reduce the need for formula feeding in mothers after cesarean delivery: Secondary analysis of the data from a randomized clinical trial. Breastfeed Med 2026:15568253261473746.
52 Gao T, Cao QN, Qiao J. Impact of press needle combining breast massage on onset of lactogenesis II in post-cesarean mothers: A randomized controlled trial. Chin J Integr Med 2026

## Substance Identification

### Substance Name

Acupuncture

### Drug Class

Breast Feeding

Lactation

Milk, Human

Acupuncture Therapy

Acupressure

Complementary Therapies

Galactogogues